# Botulinum Toxins, Therapeutic

CASRN: 93384-43-1; 93384-44-2; 953397-35-8; 1800016-51-6

## Drug Levels and Effects

### Summary of Use during Lactation

Of the therapeutically used botulinum toxins, only onabotulinumtoxinA has been studied during breastfeeding and only in cosmetic doses. It was not detectable in the milk of two women and detectable in only minute amounts in 5 others after 40 to 92 units injected into the face. A systematic review found that among 94 cases of reported breastfeeding, no adverse infant events or developmental delays were observed at 1 year.[1] International guidelines considers onabotulinumtoxinA acceptable in breastfeeding women with chronic migraine, and it is often used in nursing mothers by dermatologists, including dermatologists themselves.[2-4] High doses for other conditions have not been studied.

### Drug Levels

Maternal Levels. Four women undergoing cosmetic procedures were injected with doses ranging from 40 to 92 units of onabotulinumtoxinA. Milk samples were taken at baseline and 1, 3 and 5 hours after the injections. Two women had undetectable (<46 ng/L) levels in all samples after receiving 54 and 92 units. Two other women who received 40 and 46 units had peak milk levels of 422 ng/L and 747 ng/L, respectively.[5]

Three women were reported who received onabotulinumtoxinA at 3 sites for facial cosmetic procedures for a total dose of 64 units each. They were instructed to express 200 mL of breastmilk before treatment and 1, 6, 24, 36, 48, and 72 hours after treatment using a manual pump. In addition, milk samples were collected at 5, 6, 7, 10, and 11 days, 2 months, 4 months, 5 months and up to 1+ year after the injections. The highest concentration observed of 167 ng/L was in a sample from one woman 4 days after the injection. Levels were highest overall in the first week (82.45 to167 ng/L). After the first week, circulating BoNT/A concentrations decreased before another peak of 132.7 ng/L occurred at 2 months after the dose.[6] If the highest concentration and a dose of 150 mL/kg daily breastmilk intake are used, a breastfed infant would receive a maximum of 5 ng/kg of botulinum toxin A orally per day.

Infant Levels. Type A botulinum toxin was detected in the blood and stools of a nursing mother after ingesting fermented salmon eggs. No botulinum toxin was detected in the breastfed infant’s blood or stool on the day the mother was admitted to the hospital (3 days after the onset of illness) and no botulism organisms were detected in the infant’s stools.[7]

### Effects in Breastfed Infants

One mother breastfed her infant while she was experiencing toxicity from botulism poisoning. She breastfed her 2-month-old infant. Although the mother died, the infant had no symptoms.[8]

A woman developed botulism after ingesting fermented salmon eggs while breastfeeding her 8-month-old breastfed (extent not stated) infant. The infant developed no signs or symptoms of botulism even though she continued to nurse throughout the mother’s hospitalization.[7]

A single-center study reported 94 women who received onabotulinumtoxinA injections for chronic migraine while breastfeeding their infants. No adverse reactions were reported in the breastfed infants over the first year postpartum.[9]

A mother who was nursing a 2.5-year-old toddler received a treatment for facial wrinkles consisting of an injection of a single vial containing 85 units of “Botox” (onabotulinumtoxinA, manufacturer unknown) from a Chinese product that apparently is not sold in the United States. Two days later, her daughter experienced swelling in her mouth with prominent swelling of the upper lip. The article’s authors felt that the swelling was caused by the botulinum toxin in milk, but no specific evidence linked the swelling to the botulinum toxin other than the time course.[10]

A retrospective, single-center study reported 37 women who received onabotulinumtoxinA while breastfeeding their infants. There was no evidence that the onabotulinumtoxinA sample had a higher rate of neonatal jaundice.[11]

A survey of 177 US board-certified dermatologists found that 133 of the respondents (75%) reported administering or receiving botulinum toxin type A while breastfeeding. None reported adverse outcomes in themselves or those injected.[4]

A systematic review found that among 94 cases of reported breastfeeding, no adverse infant events or developmental delays were observed at 1 year.[1]

A case series reported 8 pregnant women who were treated with onabotulinumtoxin A for laryngeal dystonia. All the infants were breastfed while the patient received laryngeal onabotulinumtoxin A injections. No morbidity or mortality was noted in mothers or children, except for one preterm birth. All children are now alive and well, with a median age of 7.[12]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Migraine Prophylaxis) Divalproex, Erenumab, Metoprolol, Nortriptyline, Propranolol, Rimegepant, Topiramate, Valproic Acid

### References

1 Eladawi S, Koonalintip P, Ngomuo A, . The safety of onabotulinumtoxinA (OnabotA) during pregnancy and breastfeeding: Implications for chronic migraines. Life (Basel) 2026;16:1228.42652916
2 Puledda F, Sacco S, Diener HC, . International Headache Society Global Practice Recommendations for Preventive Pharmacological Treatment of Migraine. Cephalalgia 2024;44:3331024241269735.39262214
3 Ornello R, Maassen van den Brink A, Puledda F, . Migraine management during pregnancy, breastfeeding and in women planning pregnancy. Cephalalgia 2025;45:3331024251393945.41263702
4 Cucalon J, Taylor D, Tolkachjov SN, . Practice versus protocol: A survey of current botulinum toxin use during lactation and pregnancy in dermatology. Dermatol Surg 2026;52:653-6.41499679
5 Hudson C, Wilson P, Lieberman D, . Analysis of breast milk samples in lactating women after undergoing botulinum toxin injections for facial rejuvenation: A pilot study. Facial Plast Surg Aesthet Med 2024;26:523-6.38306172
6 Gu H, Xu Z, Koviazina R, . Detection of nontoxic BoNT/A levels in post-facial botox injection breastmilk. Front Drug Saf Regul 2025;4:1480515. doi:10.3389/fdsfr.2024.1480515 40979397
7 Middaugh J. Botulism and breast milk. N Engl J Med 1978;298:343.
8 Douthirt C. An outbreak of botulism in Tucumcari, New Mexico. Southwest Med 1938:51-3.
9 Wong HT, Khan R, Buture A, . OnabotulinumtoxinA treatment for chronic migraine in pregnancy: An updated report of real-world headache and pregnancy outcomes over 14 years in Hull. Cephalalgia 2025;45:3331024251327387.40326040
10 Qin M, Liang Y, Yao J, . Swollen lips in young toddler during breastfeeding following a woman’s botulinum toxin injection. J Craniofac Surg 2025;36:e1197-e9
11 Khan F, Page E, Sonneborn C, . Safety of onabotulinumtoxinA administration during second and third trimester of pregnancy and lactation. Headache 2025;65 (Suppl 1):207. doi:10.1111/head.14957
12 Aravinthan K, Patry M, Hu A. Botulinum toxin treatment in pregnant laryngeal dystonia patients: Case series and survey of current practice of Canadian laryngologists. J Otolaryngol Head Neck Surg 2025;54:19160216251392559.41235877

## Substance Identification

### Substance Name

Botulinum Toxins, Therapeutic

### CAS Registry Number

93384-43-1; 93384-44-2; 953397-35-8; 1800016-51-6

### Drug Class

Breastfeeding

Lactation

Milk, Human

Bacterial Toxins

Neuromuscular Agents

Neurotoxins